# Lindane

CASRN: 58-89-9

## Drug Levels and Effects

### Summary of Use during Lactation

Topical application of lindane can increase lindane milk levels for at least several days. Because it is potentially toxic in infants, is a persistent environmental contaminant, and possibly has estrogenic effects that could decrease lactation as well as affect the nursing infant, another agent should be used rather than lindane.[1-4]

### Drug Levels

Lindane (gamma-benzenehexachloride; gamma-Hexachlorocyclohexane) is a fat-soluble insecticide that is a persistent environmental contaminant. Residues from its use as a pesticide are found in food and subsequently in breastmilk, particularly the milkfat. Recent data from the United States are lacking, but levels appear to be trending downward in industrialized countries.[5] Hexachlorocyclohexane appears to have some estrogenic activity.[6]

Maternal Levels. A German woman with a 2-month-old breastfed infant was treated with lindane 0.3% lotion (the product available in the United States contains 1%) for scabies. The lotion was left on for 24 hours, then washed off. The extent of application was not stated, but is usually applied to all skin from the neck down. A baseline lindane concentration in breastmilk was not obtained, but the average value of lindane in mothers' milk in Germany from pesticides in the food chain at the time of the study was 30 mcg/kg of milk fat. Milk from day 4 to 10 contained lindane in the range of 500 to 900 mcg/kg of milk fat. After another repeat application of lindane, lindane was found in aa concentration of 2000 mcg/kg on day 11. Additional measurements on days 18 and 26 were 600 mcg/kg and 400 mcg/kg, respectively.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 9 mothers used lindane topically for head lice during breastfeeding. One reported irritability in her breastfed infant.[8]

### Effects on Lactation and Breastmilk

Hexachlorocyclohexane appears to have some estrogenic activity which theoretically could suppress lactation.[6]

### Alternate Drugs to Consider

Ivermectin, Permethrin, Pyrethrins

### References

1 Thomas C, Coates SJ, Engelman D, et al. Ectoparasites: Scabies. J Am Acad Dermatol 2020;82:533-48.31310840
2 Workowski KA, Bachmann LH, Chan PA, et al. Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1-187.34292926
3 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651-68.38280680
4 Centers for Disease Control and Prevention. Clinical care of scabies. https://www.cdc.gov/scabies/hcp/clinical-care/
5 LaKind JS, Amina Wilkins, A, Berlin CM, Jr. Environmental chemicals in human milk: A review of levels, infant exposures and health, and guidance for future research. Toxicol Appl Pharmacol 2004;198:184-208.15236953
6 Massart F, Harrell JC, Federico G, et al. Human breast milk and xenoestrogen exposure: A possible impact on human health. J Perinatol 2005;25:282-8.15605068
7 Senger E, Menzel I, Holzmann H. [Therapy-induced lindane concentration in breast milk]. Derm Beruf Umwelt 1989;37:167-70.2478352
8 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418

## Substance Identification

### Substance Name

Lindane

### CAS Registry Number

58-89-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Insecticides